# Water O 15

CASRN: 24286-21-3

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of water O 15 as a diagnostic agent. No information is available on the use of water O 15 during breastfeeding. United States and international authorities state that breastfeeding need not be interrupted after administration of radiopharmaceuticals containing oxygen-15.[1,2]

### Drug Levels

Oxygen 15 decays by positron emission with a half-life of 122 seconds

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mattsson S, Johansson L, Leide Svegborn S, et al. Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP 2015;44 (2 Suppl):7-321.
2 Dilsizian V, Metter D, Palestro C, Zanzonico P. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019. https://www.nrc.gov/docs/ML1903/ML19038A498.pdf

## Substance Identification

### Substance Name

Water O 15

### CAS Registry Number

24286-21-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Oxygen Radioisotopes

Diagnostic Agents